# Cocaine

CASRN: 50-36-2

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available on the medical use of cocaine in nursing mothers. However, because of its chemical nature, high concentrations of cocaine are expected in milk.[1,2] Cocaine and its metabolites are detectable in breastmilk, although data are from random breastmilk screening of mothers who used cocaine recreationally rather than controlled studies. Cocaine breastmilk concentrations have varied over 100-fold in these reports. Newborn infants are extremely sensitive to cocaine because they have not yet developed the enzyme that inactivates it and serious adverse reactions have been reported in a newborn infant exposed to cocaine via breastmilk.

Cocaine should not be used by nursing mothers or smoked (such as with "crack") by anyone in the vicinity of infants because the infants can be exposed by inhaling the smoke.[3,4] Other factors to consider are the possibility of positive urine tests in breastfed infants which might have legal implications, and the possibility of other harmful contaminants in street drugs. A breastfeeding abstinence period of 24 hours has been suggested for women who occasionally use cocaine while breastfeeding, based on the rapid elimination of cocaine by the mother.[5] Some authors have proposed that breastfeeding be discontinued only for those infants who test positive for cocaine exposure.[6]

### Drug Levels

Cocaine is metabolized to benzoylecgonine which serves as a marker for cocaine ingestion. Other cocaine metabolites include ecgonine methyl ester and norcocaine. When cocaine and alcohol are taken together, cocaethylene is produced; its metabolite is ethylbenzoylecgonine. Both of these compounds are markers for concurrent use of cocaine and alcohol.

Maternal Levels. A woman reported using 500 mg of cocaine intranasally over a 4-hour period. Her milk contained about 10 to 15 mcg/L of cocaine 12 hours after ingestion that slowly decreased until 36 hours after the last use when it was unmeasurable. The benzoylecgonine concentration in her breastmilk was about 400 mcg/L at 12 hours after ingestion and dropped to undetectable levels by 36 hours post-ingestion.[7]

Screening of breastmilk samples of 11 postpartum women who admitted to having used cocaine prepartum found primarily cocaine and benzoylecgonine in breastmilk of 6 of the women. Ecgonine methyl ester was usually not detected and only traces of norcocaine were detected unless cocaine concentrations were very high. One such subject had a concentration of 12.1 mg/L of cocaine, 4.1 mg/L of benzoylecgonine and 119 mg/L of ecgonine methyl ester in her breastmilk.[8]

Ethylbenzoylecgonine has been found in the breastmilk of mothers who ingested cocaine and alcohol.[1]

Breastmilk from a mother who admitted to cocaine use contained cocaine in a concentration of 5 mcg/L. The time of collection and amount of drug use was not stated.[9]

Two women suspected of cocaine use prior to delivery had cocaine levels of 8 and 10.3 mcg/L in their colostrum. Benzoylecgonine (7.8 mcg/L) and the pyrolytic products anhydroecgonine methyl ester (9.5 mcg/L) and anhydroecgonine (9.8 mcg/L) were also detected in the mother with the higher cocaine level in colostrum. The pyrolytic products resulted from smoking crack cocaine.[10]

A woman who admitted to 2 years of cocaine and cannabis use provided breastmilk sample 24 hours after delivery. She denied use of any drugs of abuse in the previous few days, although her urine was positive for cannabinoids and cocaine metabolites. Her breastmilk contained 138 mcg/L of cocaine. Neither norcocaine nor cocaethylene were detectable in breastmilk.[11]

Single breastmilk samples were collected at a Brazilian hospital from 5 women who were suspected of abusing cocaine. Breastmilk cocaine concentrations ranged from 24.4 to 38.5 mcg/L with an average of 32.4 mcg/L. Benzoylecgonine concentrations ranged from 17.6 to 91.2 mcg/L with an average concentration of 53.5 mcg/L. The ratios of cocaine to benzoylecgonine varied, possibly related to the time of cocaine ingestion prior to breastmilk sampling. The milk of one woman contained no detectable cocaine or metabolite.[12]

Infant Levels. A woman who was breastfeeding her 2-week-old daughter reported using about 500 mg of cocaine intranasally over a 4-hour period and breastfeeding 5 times during this period. The infant's urine contained cocaine in a concentration of about 100 mcg/L at 4 and 12 hours after the mother's last cocaine use; the concentration dropped to low levels by 24 hours, but was detectable up to 60 hours after the mother's last dose. The urine benzoylecgonine concentration was over 200 mcg/L at 4 hours post-ingestion and nearly 900 mcg/L at 12 hours post-ingestion. The benzoylecgonine concentration remained near 200 mcg/L until 60 hours post-ingestion when it was undetectable.[7]

A 6-week-old, full-term, breastfed infant was found to have benzoylecgonine in his urine. The infant appeared to be normal but was small for his age. The infant's mother reported using cocaine throughout pregnancy and postpartum.[13]

A retrospective study by a toxicology service in Italian hospital identified 11 of 124 infants admitted to the emergency department over a 7-year period in whom cocaine and/or benzoylecgonine were found in the urine. The investigators believed that the exposure was via either breastfeeding or inhalation of the smoke from crack cocaine used in proximity to the infant.[14]

A 10-day-old infant was breastfed by a cocaine-addicted mother who reported inhaling 10 lines of cocaine 5 to 6 hours previously. A qualitative screening immunochromatography test (Abon) detected cocaine and metabolites (cut off >300 mcg/L) in urine and plasma samples from the baby.[15]

### Effects in Breastfed Infants

A woman who was breastfeeding her 1-week-old daughter reported using a "dab" of cocaine on her lower gum and nursing her infant with no effect on her infant's behavior or sleep pattern. One week later she used about 500 mg of cocaine intranasally over a 4-hour period and breastfed 5 times during this period. Three hours after first ingesting the cocaine, the mother noted that her infant became markedly irritable, had dilated pupils, and began vomiting and having diarrhea. The infant became increasingly irritable and was taken to the emergency room 4 hours later. On examination, the infant was found to be tremulous and irritable with frequent startling after minimal stimulation, and to have high-pitched crying, hyperactive reflexes, mood lability, and hypertension. The infant also had some signs of fetal alcohol syndrome. The infant remained irritable 12 hours after the last cocaine exposure and remained tremulous and easily startled 24 hours after the last exposure. Irritability and tremulousness slowly abated over the subsequent 24 hours. Mild hypertension persisted up to 72 hours after the last cocaine exposure via breastmilk.[7]

The mother of an 11-day-old infant applied cocaine powder to her nipples for pain relief. She then breastfed her infant using a breast shield that allowed protrusion of her nipples. Three hours later, she found the infant gasping, choking and blue. On arrival at the emergency room, the infant was ashen and cyanotic. He had hypertension, tachycardia, shallow breathing, hypothermia and was in status epilepticus. Seizures resolved in a few hours after treatment and the infant was discharged at 16 days of age with no apparent sequelae.[16] Although the infant's cocaine exposure was not via the drug in breastmilk, it illustrates the extreme risk of exposure of young infants to cocaine.

A one month and 3 day-old infant born at 36 weeks of gestation was brought to the emergency room with hypoactivity, sensory impairment and nose bleeding. The infant was afebrile, irritated, tearful, but with no signs of ventilatory effort or active bleeding. Tests showed leukocytosis, mild metabolic acidosis, increased serum glutamic-oxaloacetic transaminase and abnormal coagulation tests. Toxicological screening revealed cocaine in the infant’s plasma and the mother admitted to using cocaine and marijuana. The infant was reportedly breastfed, but the amount was not stated. During a 4-day hospitalization, the patient had two seizures, with movements of the upper limbs and oxygen desaturation. The authors attributed the infant’s symptoms to cocaine withdrawal.[17]

A 10-day-old infant was breastfed by a cocaine-addicted mother who reported inhaling 6 lines of cocaine over the 5.5 to 11.5 hours prior to breastfeeding. The infant presented to the emergency department with cyanosis, abundant sialorrhea, and no clinical response with stimulation. In addition to finding cocaine in the infant’s blood, the activated partial thromboplastin time (aPTT ) was greater than the upper limit of normal (32 seconds) at 52.5 seconds. The infant was discharged 8 days later. The authors proposed a mechanism whereby cocaine could affect the infant’s aPTT.[15]

A retrospective observational study reviewed children aged 0 to 10 years with suspected or confirmed cocaine exposure reported to French Poison Centers from January 1, 2020, to December 31, 2024. To be included, infants had to have a positive analytical toxicology result in urine screening performed by hospital-affiliated clinical or forensic laboratory. Twelve infants were exposed via breastfeeding; 10 were under 1 month of age, one was between 1 and 2 months and one was between 1 and 3 years of age. One fatal case (PSS 4) involved a 3-month-old male infant found dead at home; postmortem blood analysis confirmed the presence of cocaine. The child was found dead in his bed after breastfeeding from his mother, a cocaine user. While the cocaine levels were considered too low to have caused the death, the parents refused the autopsy. Toxicological screening revealed no other substances. In one case, an 11-day-old female infant, exclusively breastfed, presented with respiratory distress, muscular hypertonia, jaundice, and cardiac arrest upon emergency service arrival. Hair analysis revealed a cocaine concentration of 24.289 ng/mg; urinary cocaine was 52.5 mcg/L, suggesting both prenatal and breastfeeding exposure. The patient required resuscitation at home. No other substances were detected in the blood screening. A second fatal case involved a 3-month-old male infant found dead at home; postmortem blood analysis confirmed the presence of cocaine. The child was found dead in his bed after breastfeeding from his mother, a cocaine user. While the cocaine levels were considered too low to have caused the death, the parents refused the autopsy. Toxicological screening revealed no other substances.[18]

### Effects on Lactation and Breastmilk

Long-term cocaine use can result in chronic, low-level hyperprolactinemia.[19-21] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Mothers who use cocaine initiate breastfeeding of their infants less frequently than mothers who do not use cocaine.[22,23]

### References

1 Dickson PH, Lind A, Studts P, et al. The routine analysis of breast milk for drugs of abuse in a clinical toxicology laboratory. J Forensic Sci 1994;39:207–14.8113701
2 Bailey DN. Cocaine and cocaethylene binding to human milk. Am J Clin Pathol 1998;110:491–4.9763035
3 Bateman DA, Heagarty MC. Passive freebase cocaine ('crack') inhalation by infants and toddlers. Am J Dis Child 1989;143:25–7.2910042
4 Heidemann SM, Goetting MG. Passive inhalation of cocaine by infants. Henry Ford Hosp Med J 1990;38:252–4.2086554
5 Cressman AM, Koren G, Pupco A, et al. Maternal cocaine use during breastfeeding. Can Fam Physician 2012;58:1218–9.23152457
6 Sarkar M, Djulus J, Koren G. When a cocaine-using mother wishes to breastfeed: Proposed guidelines. Ther Drug Monit 2005;27:1–2.15665737
7 Chasnoff IJ, Lewis DE, Squires L. Cocaine intoxication in a breast-fed infant. Pediatrics 1987;80:836–8.3684393
8 Winecker RE, Goldberger BA, Tebbett IR, et al. Detection of cocaine and its metabolites in breast milk. J Forensic Sci 2001;46:1221–3.11569568
9 Marchei E, Escuder D, Pallas CR, et al. Simultaneous analysis of frequently used licit and illicit psychoactive drugs in breast milk by liquid chromatography tandem mass spectrometry. J Pharm Biomed Anal 2011;55:309–16.21330091
10 D'Avila FB, Pereira AG, Salazar FR, et al. Determination of cocaine/crack biomarkers in colostrum by LC-MS following protein precipitation. J Pharm Biomed Anal 2015;103:67–72.25462122
11 Silveira GO, Belitsky IT, Loddi S, et al. Development of a method for the determination of cocaine, cocaethylene and norcocaine in human breast milk using liquid phase microextraction and gas chromatography-mass spectrometry. Forensic Sci Int 2016;265:22–8.26826849
12 Dos Santos RR, Nunes Paiva MJ, Veloso JC, et al. Efficient extraction method using magnetic carbon nanotubes to analyze cocaine and benzoylecgonine in breast milk by GC/MS. Bioanalysis 2017;9:1655–66.29095043
13 Shannon M, Lacouture PG, Roa J, et al. Cocaine exposure among children seen at a pediatric hospital. Pediatrics 1989;83:337–42.2783999
14 Focardi M, Bianchi I, Romanelli M, et al. Accidental detection of cocaine in urine in pediatric patients: Case series and literature review. Children (Basel) 2024;11:1301.39594876
15 Cardoso LC, Paier KAV, Reginato FZ, et al. Ten-day-old neonate cocaine exposure and human milk: A case report. J Hum Lact 2025;41:535–40.41014138
16 Chaney NE, Franke J, Wadlington WB. Cocaine convulsions in a breast-feeding baby. J Pediatr 1988;112:134–5.3335951
17 Neto EBP, Pilger VC, Tondo LP, et al. Neonatal abstinence from cocaine, a case report. Sci Med (Porto Alegre) 2022;32:1–5. doi:10.15448/1980-6108.2022.1.42602
18 von Fabeck K, Glaizal M, Schmitt C, et al. Invisible victims: Rising pediatric cocaine exposures in France (2020-2024) - insights from the national poison center database. Front Toxicol 2026;8:1732108.41821759
19 Mello NK, Mendelson JH. Cocaine's effects on neuroendocrine systems: Clinical and preclinical studies. Pharmacol Biochem Behav 1997;57:571–99.9218281
20 Patkar AA, Hill KP, Sterling RC, et al. Serum prolactin and response to treatment among cocaine-dependent individuals. Addict Biol 2002;7:45–53.11900622
21 Elman I, Lukas SE. Effects of cortisol and cocaine on plasma prolactin and growth hormone levels in cocaine-dependent volunteers. Addict Behav 2005;30:859–64.15833589
22 England L, Brenner R, Bhaskar B, et al. Breastfeeding practices in a cohort of inner-city women: The role of contraindications. BMC Public Health 2003;3:28.12930560
23 Bauer CR, Langer JC, Shankaran S, et al. Acute neonatal effects of cocaine exposure during pregnancy. Arch Pediatr Adolesc Med 2005;159:824–34.16143741

## Substance Identification

### Substance Name

Cocaine

### CAS Registry Number

50-36-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local

Dopamine Uptake Inhibitors

Street Drugs

Vasoconstrictor Agents